# Luspatercept

CASRN: 1373715-00-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of luspatercept during breastfeeding. Because luspatercept is a large protein molecule with a molecular weight of 76,000 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. Until more data become available, the manufacturer recommends that breastfeeding be discontinued during luspatercept therapy and for 3 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Luspatercept

### CAS Registry Number

1373715-00-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hematinics

Hematopoietic Cell Growth Factors